# Dantrolene

CASRN: 7261-97-4

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the long-term use of dantrolene during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. After short-term use, the drug would be expected to be eliminated from milk in 1 to 2 days.

### Drug Levels

Maternal Levels. Administration of several intravenous dantrolene doses were given over 3 days to a postpartum mother in divided doses. Total daily dosages were 720 mg on day 1, 320 mg on day 2, and 80 mg on day 3. A milk level of 1.2 mg/L was measured on day 2 after a total of 640 mg had been given. The milk level was 50 mcg/L on day 4 about 35 hours after the last dose. Dantrolene half-life in milk was 9.2 hours.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Baclofen

### References

1 Fricker RM, Hoerauf KH, Drewe J, et al. (1998). Secretion of dantrolene into breast milk after acute therapy of a suspected malignant hyperthermia crisis during cesarean section. Anesthesiology.

## Substance Identification

### Substance Name

Dantrolene

### CAS Registry Number

7261-97-4

### Drug Class

Breast Feeding

Lactation

Muscle Relaxants, Central